# Stevia

CASRN: 91722-21-3

## Drug Levels and Effects

### Summary of Use during Lactation

Stevia (Stevia rebaudiana) leaves contain rebaudiosides and steviosides. The stevia leaf has been studied for treating diabetes and hypertension, although results are equivocal. Stevia has no specific lactation-related uses. No data exist on the excretion of any components of stevia into breastmilk or on the safety and efficacy of stevia in nursing mothers or infants. Rebaudioside A is "generally recognized as safe" (GRAS) as a sweetening agent for foods by the U.S. Food and Drug Administration. Ingestion of diet drinks containing low-calorie sweeteners might increase the risk of vomiting in breastfed infants. Some authors suggest that women may wish to limit the consumption of nonnutritive sweeteners while breastfeeding because their effect on the nursing infants are unknown.[1,2] Although risk to the breastfed infant appears to be low, an alternate artificial sweetener with more data available may be preferred, especially while nursing a newborn or preterm infant.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A cross-sectional survey assessed the dietary history of US mothers nursing infants between 11 and 15 weeks of age. The survey was used to estimate the amount of diet soda and fruit drinks consumed by the women. There were no statistically significant differences in infants’ weight or z-scores based on low calorie sweetener exposure. However, infants exposed to low calorie sweetener in milk once or less per week had a statistically significantly higher risk of vomiting than those who were not exposed. Greater exposure was not associated with vomiting. It was not possible to assess the effects of specific sweeteners.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspartame

### References

1 Sylvetsky A, Gardner A, Bauman V, et al. Nonnutritive sweeteners in breast milk. J Toxicol Environ Health A 2015;78:1029-32.26267522
2 Rother K, Sylvetsky A, Schiffman S. Non-nutritive sweeteners in breast milk: Perspective on potential implications of recent findings. Arch Toxicol 2015;89:2169-71.26462668
3 Huang Q, Murphy J, Smith E, et al. Diet beverage intake during lactation and associations with infant outcomes in the infant feeding practices study II. Nutrients 2021;13:3154.34579031

## Substance Identification

### Substance Name

Stevia

### Scientific Name

Stevia rebaudiana

### CAS Registry Number

91722-21-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Plants, Medicinal

Sweetening Agents